# Liothyronine

CASRN: 6893-02-3

## Drug Levels and Effects

### Summary of Use during Lactation

Liothyronine (T3) is a normal component of human milk. If replacement doses of liothyronine are required by the mother, it is not a reason to discontinue breastfeeding. The American Thyroid Association recommends that subclinical and overt hypothyroidism should be treated with levothyroxine in lactating women seeking to breastfeed.[1] Liothyronine dosage requirement may be increased in the postpartum period compared to prepregnancy requirements patients with Hashimoto's thyroiditis.[2]

### Drug Levels

Milk levels of liothyronine have not been measured after exogenous administration of T3 in humans. Although somewhat controversial, liothyronine, unlike levothyroxine (T4), might pass into milk in amounts that affect infant thyroid status.[3-7]

In a study of a new analytic technique, concentrations of several thyroid hormones were measured in 30 milk samples. The mean levothyroxine (T4) concentration was 94 mcg/L (range 48 to 194 mcg/L) and the mean dextrothyroxine concentration was 135 mcg/L (range 115 to 158 mcg/L). The mean liothyronine (T3) concentration was 52 mcg/L (range 32 to 109 mcg/L) and the mean reverse T3 concentration was 65 mcg/L (range 21 to 180 mcg/L). Among the 30 samples, the dextrothyroxine concentration was always higher than the levothyroxine concentration, and the reverse T3 concentration was always higher than the liothyronine concentration. The levels of levothyroxine were also higher than liothyronine levels. Several other thyroid hormones such as thyroxine; monoiodothyronine; 3,3 and 3,5-diiodothyronine were also measured.[8]

Maternal Levels. In a study of 56 mothers with thyroid disorders, 50 had hypothyroidism and were being treated with levothyroxine; 5 mothers had controlled hyperthyroidism with no medications and 1 had hyperthyroidism treated with a medication. Milk levels of thyroid hormones were free T4 4.5 ng/L, total T4 29.6 mcg/L, free T3 2.3 ng/L and total T3 0.35 mcg/L. The average milk to serum level ratios over the period were free T4 0.32, total T4 0.3, free T3 0.78 and total T3 0.26. Levels of free and total T3 and total T4 in milk were positively correlated with their respective plasma levels.[9]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date. However, the thyroid hormone content of human milk from the mothers of very preterm infants appears not to be sufficient to affect the infant’s thyroid status.[10]

### Effects on Lactation and Breastmilk

Adequate thyroid hormone serum levels are required for normal lactation. Replacing deficient thyroid levels should improve milk production caused by hypothyroidism. Supraphysiologic doses of liothyronine would not be expected to further improve lactation.

### Alternate Drugs to Consider

Levothyroxine

### References

1 Korevaar TIM, Leung AM, Alexander EK, et al. American Thyroid Association 2026 Guidelines for Thyroid Disease in Preconception, Pregnancy, and Postpartum. Thyroid 2026;36:481–544.42219800
2 Galofré JC, Haber RS, Mitchell AA, et al. Increased postpartum thyroxine replacement in Hashimoto's thyroiditis. Thyroid 2010;20:901–8.20615129
3 Sato T, Suzuki Y. Presence of triiodothyronine, no detectable thyroxine and reverse triiodothyronine in human milk. Endocrinol Jpn 1979;26:507–13.499092
4 Varma SK, Collins M, Row A, et al. Thyroxine, tri-iodothyronine, and reverse tri-iodothyronine concentrations in human milk. J Pediatr 1978;93:803–6.712487
5 Mallol J, Obregon MJ, Morreale de Escobar GM. Analytical artifacts in radioimmunoassay of L-thyroxin in human milk. Clin Chem 1982;28:1277–82.7074933
6 Oberkotter LV, Tenore A. Separation and radioimmunoassay of T3 and T4 in human breast milk. Horm Res 1983;17:11–8.6551313
7 Koldovský O. Hormones in milk. Vitam Horm 1995;50:77–149.7709605
8 de Fátima Vélez-Pérez R, Arias-Borrego A, Velasco I, et al. Liquid chromatography (ion mobility) coupled to organic and inorganic mass spectrometry for determination of eight thyroid hormones in human milk with enantiomeric separation of thyroxine. Food Chem 2025;492:145542.40716411
9 Zhang Q, Lian XL, Chai XF, et al. Relationship between maternal milk and serum thyroid hormones in patients with thyroid related diseases. Zhongguo Yi Xue Ke Xue Yuan Xue Bao 2013;35:427–31.23987491
10 van Wassenaer AG, Stulp MR, Valianpour F, et al. The quantity of thyroid hormone in human milk is too low to influence plasma thyroid hormone levels in the very preterm infant. Clin Endocrinol (Oxf) 2002;56:621–7.12030913

## Substance Identification

### Substance Name

Liothyronine

### CAS Registry Number

6893-02-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Thyroid Hormones